# Thiopental

CASRN: 76-75-5

## Drug Levels and Effects

### Summary of Use during Lactation

Amounts of thiopental in milk are very small. Existing data indicate that no waiting period is required before resuming breastfeeding after thiopental anesthesia. Breastfeeding can be resumed as soon as the mother has recovered sufficiently from general anesthesia to nurse.[1,2] When a combination of anesthetic agents is used for a procedure, follow the recommendations for the most problematic medication used during the procedure. Monitor the infant for sedation and poor feeding.

### Drug Levels

Maternal Levels. A woman was given a continuous infusion of thiopental sodium. During the infusion and 25 minutes after its initiation and about 800 mg had been given, a milk level of 7.5 mg/L was measured. A second milk sample taken 14 minutes after completion of the infusion of a total of 1125 mg contained 20 mg/L.[3] The accuracy and specificity of this old analytic technique were not well defined.

Four women who received intravenous thiopental for anesthesia induction prior to cesarean section had breastmilk samples taken on days 1 and 2 postpartum. Exact doses were not specified, but were in the range of 200 to 500 mg. The average milk concentrations were 1.96 mg/L on day 1 and 0.55 mg/L on day 2.[4]

Eight women admitted for cesarean section were given an average of 5 mg/kg (range 3.8 to 6.3 mg/kg) of intravenous thiopental for induction of anesthesia. The highest colostrum level occurred in the first nursing after the termination of anesthesia (about 4 hours after the dose) and was estimated to be 0.34 mg/L. Eight other women who were at least 2 weeks postpartum were given an average of 5.4 mg/kg (range 4.4 to 7 mg/kg) of intravenous thiopental for induction of anesthesia. The highest milk level occurred in the first nursing after the termination of anesthesia (about 4 hours after the dose) and was estimated to be 0.9 mg/L. The authors concluded that the doses received by the infant were negligible and unlikely to affect the infant.[1]

Twenty women undergoing cesarean section received 5 mg/kg of thiopental intravenously for induction of anesthesia. Average colostrum levels were 1.98 mg/L (range 0.6 to 4.7 mg/L) at 30 minutes, 0.91 mg/L (range 0.4 to 1.9 mg/L) at 4 hours, and 0.59 mg/L (range 0.3 to 1.4 mg/L) at 9 hours after the end of the dose.[5]

Infant Levels. Seven mothers received intravenous thiopental for anesthesia induction prior to cesarean section. The half-lives of the drug were calculated in their infants from urinary excretion data. The breastfed infants excreted an average of 0.0067% of the maternal dose in their urine while the nonbreastfed infants excreted an average of 0.008% in their urine. The half-life of thiopental in the 4 infants who were breastfed was not different from that of the 3 formula-fed infants. These findings indicate that trivial amounts of thiopental are received in breastmilk by infants in the first 2 days of life after administration to their mothers during delivery.[4]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A randomized, but nonblinded, study in women undergoing cesarean section compared epidural anesthesia with bupivacaine to general anesthesia with intravenous thiopental 4 mg/kg and succinylcholine 1.5 mg/kg for induction followed by nitrous oxide and isoflurane. The time to the first breastfeed was significantly shorter (107 vs 228 minutes) with the epidural anesthesia than with general anesthesia. This difference was probably caused by the anesthesia's effects on the infant, because the Apgar and neurologic and adaptive scores were significantly lower in the general anesthesia group of infants.[6]

### Alternate Drugs to Consider

Dexmedetomidine, Etomidate, Methohexital, Propofol

### References

1 Andersen LW, Qvist T, Hertz J, et al. Concentrations of thiopentone in mature breast milk and colostrum following an induction dose. Acta Anaesthesiol Scand 1987;31:30-2.3825473
2 Lee JJ, Rubin AP. Breast feeding and anaesthesia. Anaesthesia 1993;48:616-25.8346780
3 Mayo CW, Schlicke CP. Appearance of a barbiturate in human milk. Proc Staff Meet Mayo Clin 1942;17:87-8.
4 Morgan DJ, Beamiss CG, Blackman GL, et al. Urinary excretion of placentally transferred thiopentone by the human neonate. Dev Pharmacol Ther 1982;5:136-42.7151645
5 Esener Z, Sarihasan B, Guven H, et al. Thiopentone and etomidate concentrations in maternal and umbilical plasma, and in colostrum. Br J Anaesth 1992;69:586-8.1467101
6 Sener EB, Guldogus N, Karakaya D, et al. Comparison of neonatal effects of epidural and general anesthesia for cesarean section. Gynecol Obstet Invest 2003;55:41-5.12624551

## Substance Identification

### Substance Name

Thiopental

### CAS Registry Number

76-75-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anesthetics, Intravenous

Hypnotics and Sedatives